# Vedolizumab

CASRN: 943609-66-3

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal vedolizumab injections produce low levels in breastmilk and do not appear to adversely affect the nursing infant. Because vedolizumab is a large protein molecule with a molecular weight of about 147,000 Da, it is likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[1] Vedolizumab does not affect SIgA, SIgM levels in milk in women with inflammatory bowel disease. Waiting for at least 2 weeks postpartum to resume therapy suspended during pregnancy may minimize transfer to the infant.[2] However, in infants of mothers who received vedolizumab during late pregnancy, continued use while breastfeeding did not prolong vedolizumab elimination by the infant. Most experts and guidelines consider vedolizumab to be probably acceptable during nursing.[3-7]

### Drug Levels

Maternal Levels. Five lactating women who were receiving vedolizumab for inflammatory bowel disease donated milk samples at various times after receiving a dose of 300 mg intravenously. Four were on maintenance therapy every 1 to 2 months and 1 was in the induction phase and had received 2 doses of the drug 2 weeks apart. Peak breastmilk levels occurred from day 2 to 4 after the dose with a median of day 3. Peak milk concentrations averaged 354 mcg/L (range 108 to 478 mcg/L). One woman collected milk daily for 15 days. Her breastmilk levels slowly decreased from a peak of 405 mcg/L on day 3 to 101 mcg/L on day 15.[8]

Five nursing mothers were receiving vedolizumab 300 mg intravenously at unspecified intervals for inflammatory bowel disease. Breastmilk samples were collected before a dose, 30 minutes after a dose and twice daily thereafter for up to 14 days. Trough samples contained 124 to 228 mcg/L of vedolizumab. Most breastmilk levels were between 150 and 250 mcg/L. The highest breastmilk vedolizumab milk levels were variable and ranged from 196 to 318 mcg/L on days 3 through 7. Using the highest level measured, the authors calculated that an infant would receive an oral dose of 0.048 mg/kg of vedolizumab daily.[9]

Eleven women with inflammatory bowel disease were receiving vedolizumab 300 mg intravenously at various intervals, nine every 8 weeks, and one each at 4 and 6 week intervals. Complete expression of breastmilk from both breasts was done before the dose on day 1 of therapy, then at 1 hour after the infusion and on days 1, 4, 8, 15, 29, and 57 after the dose. The median time to peak milk level was 3 to 4 days after the dose with a mean peak value of 252 mcg/L (range, 98 to 561 mcg/L) in the 9 women receiving the drug every 8 weeks. The mean trough level at 57 days after the dose was 47.1 mcg/L. The average daily milk concentration over the 8-week dosing interval was 129 mcg/L (range 0.032 to 0.26 mcg/L). The geometric mean daily infant dosage was 0.019 mg/kg daily. In the patient receiving the drug every 6 weeks, the peak milk level was 165 mcg/L. In the patient receiving the drug every 4 weeks, the peak milk level was 305 mcg/L and the trough level was 154 mcg/L.[10]

Infant Levels. Forty-three women who received vedolizumab 300 mg at a median of every 8 weeks (range 4-8 weeks) and delivered a live newborn were studied. They continued to receive vedolizumab at similar intervals postpartum with the first treatment given at median 3 (range 0-18) weeks after delivery. Thirty-six of the women breastfed (extent not stated) their infants for a median of 4 months (range 0.5 to 19 months). The study found no correlation between the rate of infant serum vedolizumab level decline and whether they were breastfed.[11]

### Effects in Breastfed Infants

Eight women who were receiving vedolizumab for inflammatory bowel disease were breastfeeding their infants (extent not stated). Dosages were 300 mg intravenously, at 1 to 2 month intervals for 6 and starting during induction for 2 women. No increase in general or gastrointestinal tract infections were seen in the newborns up to 10 months of age and all infants reached their development milestones.[8]

Five infants were breastfed by mothers receiving vedolizumab 300 mg intravenously at regular intervals. The infants all had normal developmental milestones at 3.5 to 10 months of age. All of the infants received routine inactivated vaccines without complications.[9]

A multicenter, retrospective study in Belgium reported on women with inflammatory bowel disease during pregnancy and postpartum who received vedolizumab (n = 23). Twelve infants were breastfed by their mothers and were followed for a median of 23 weeks (IQR 10 to 60 weeks). Twenty of the 23 infants were vaccinated with the standard Belgian protocol, with 9 also receiving rotavirus vaccination. No serious infections or malignancies were reported.[12] In an extension of this study, 70 women who received vedolizumab were compared to those who received a TNF antagonist (n = 162) and to those who received no biological or immunologic therapy (n = 163). Sixty-two percent of women on vedolizumab breastfed their infants compared to 60% and 64% in the other groups. No malignancies were reported in any of the children during the first year of life and the number of infant infections were not statistically different between the groups. The extent of breastfeeding and postpartum dosage regimens were not stated.[13]

The manufacturer’s database of adverse drug events up to May 2019 included 21 adverse events in breastfed infants whose mothers were taking vedolizumab. None of them were judged to be serious.[10] No details of the types of reactions were reported.

Forty-three women who received vedolizumab 300 mg at a median of every 8 weeks (range 4-8 weeks) and delivered a live newborn were studied. They continued to receive vedolizumab at similar intervals postpartum with the first treatment given at median 3 (range 0-18) weeks after delivery. Thirty-six of the women breastfed (extent not stated) their infants for a median of 4 months (range 0.5 to 19 months). The study found no correlation between breastfeeding and infection rate among the infants and normal development in the infants.[11]

The DUMBO registry in Spain followed 526 newborns whose mothers had inflammatory bowel disease. During breastfeeding 2% of the mothers were receiving vedolizumab. Of children breastfed at least until month 6 and whose mothers were taking a biologic, 60% received the 1^st^ and 2^nd^ dose of rotavirus vaccine, and 17% the 3rd dose. Of children breastfed at least until month 12 and whose mothers were taking a biologic, 97% received the 1st dose of MMR vaccine; and from children breastfed at least until month 15 and whose mothers were under biologics, 84% received the 1^st^ dose of varicella vaccine. No serious adverse events related to live vaccines were reported.[14]

In a prospective multicenter study, 16 infants were born to mothers taking vedolizumab during pregnancy. Of these, 12 were breastfed for a median of 11 months (range 1 to 21 months). Infants were followed for at least 6 months and a median of 18 months. All children had normal growth and normal psychomotor development at 12 or more months of age. All but one child exposed to ustekinumab receive mandatory vaccinations with non-live vaccines without any serious or unexpected adverse events.[15]

A woman with ulcerative colitis received vedolizumab (dose not stated) during pregnancy and postpartum, delivering twins by cesarean section at 34 weeks of gestation. She breastfed (extent not stated) her infants who maintained adequate developmental growth for their age.[16]

An infant whose mother was taking tofacitinib 5 mg twice daily and vedolizumab 300 mg every 4 weeks for ulcerative colitis postpartum was followed. She breastfed her infant exclusively for the first 6 months postpartum, and continued breastfeeding for at least 16 months. The child demonstrated normal growth and psychomotor development. The infant received 3 doses of a required hexavalent vaccine (tetanus, diphtheria, polio, pertussis, hepatitis B, and Haemophilus influenza type B) as well as optional non-live vaccines (pneumococcal and meningococcal vaccines) on schedule at 3, 5, and 14 months, with no adverse events reported. At 12 months of age, the child contracted chickenpox, which had a mild course. No other infectious complications were noted. A blood sample was collected from the child at 15 months. Laboratory analysis revealed normal levels of immunoglobulin classes, except for a slightly reduced total IgG antibody level and non-significant anemia. The titers of post-vaccination antibodies were within the typical range for a healthy population, indicating a normal response to vaccination. Extended T-cell and B-cell immunophenotyping was normal, except for mild, non-significant deviations in some T-cell and B-cell populations. The neonatal screening for severe combined immunodeficiency (SCID) was negative. No severe or clinically meaningful pathological findings were observed.[17]

A multicenter study in Spain prospectively followed women treated for inflammatory bowel disease with biological agents, mostly anti-TNF agents. Overall, 29% of infants exposed to a biologic agent were also exposed to azathioprine or mercaptopurine and almost all were exposed during both pregnancy and lactation. Seven infants were exposed to vedolizumab during lactation for a mean duration of 30.4 weeks. No adverse impact of biologics exposure was found on the psychomotor development of infants for up to 1 year of age.[18]

### Effects on Lactation and Breastmilk

A study of the milk of women with or without inflammatory bowel disease (IBD) found that the use of vedolizumab to treat IBD did not affect the amount of SIgA or SIgM in the milk.[19]

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
2 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
3 Mahadevan U, Robinson C, Bernasko N, . Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508-24.30658060
4 Picardo S, Seow CH. A pharmacological approach to managing inflammatory bowel disease during conception, pregnancy and breastfeeding: Biologic and oral small molecule therapy. Drugs 2019;79:1053-63.31183768
5 Laube R, Selinger CP, Seow CH, . Australian inflammatory bowel disease consensus statements for preconception, pregnancy and breast feeding. Gut 2023;72:1040-53.36944479
6 Torres J, Chaparro M, Julsgaard M, . European Crohn’s and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1-27.36005814
7 Mahadevan U, Seow CH, Barnes EL, . Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1-S60.40874901
8 Lahat A, Shitrit AB, Naftali T, . Vedolizumab levels in breast milk of nursing mothers with inflammatory bowel disease. J Crohns Colitis 2018;12:120-3.28961712
9 Julsgaard M, Kjeldsen J, Bibby BM, . Vedolizumab concentrations in the breast milk of nursing mothers with inflammatory bowel disease. Gastroenterology 2018;154:752-4 e1.28988916
10 Sun W, Fennimore B, Beaulieu DB, . Vedolizumab concentrations in breast milk: Results from a prospective, postmarketing, milk-only lactation study in nursing mothers with inflammatory bowel disease. Clin Pharmacokinet 2021;60:811-8.33544318
11 Julsgaard M, Baumgart DC, Baunwall SMD, . Vedolizumab clearance in neonates, susceptibility to infections and developmental milestones: a prospective multicentre population-based cohort study. Aliment Pharmacol Ther 2021;54:1320-9.34472644
12 Moens A, Van Hoeve K, Humblet E, . Outcome of pregnancies in female patients with inflammatory bowel diseases treated with vedolizumab. J Crohns Colitis 2019;13:12-8.30281093
13 Moens A, van der Woude CJ, Julsgaard M, . Pregnancy outcomes in inflammatory bowel disease patients treated with vedolizumab, anti-TNF or conventional therapy: results of the European CONCEIVE study. Aliment Pharmacol Ther 2020;51:129-38.31692017
14 Chaparro Sanchez M, García Donday M, Rubio S, . Live vaccines in children exposed to biological agents for IBD in utero and/or during breastfeeding: Are they safe? Results from the Dumbo registry of GETECCU. United European Gastroenterol J 2022;10:757-8. doi:10.1002/ueg2.12295
15 Mitrova K, Pipek B, Bortlik M, . Safety of ustekinumab and vedolizumab during pregnancy-pregnancy, neonatal, and infant outcome: A prospective multicentre study. J Crohns Colitis 2022;16:1808-15.35708729
16 Pinto FPJ, Dutra RM, Almeida LC, . Vedolizumab safety during pregnancy and lactation in a patient with ulcerative colitis: A case report. Clin Exp Gastroenterol 2024;17:165-71.38799766
17 Mitrova K, Kostrejova M, Zdychyncova K, . Effect of tofacitinib exposure in utero and during breastfeeding on the immune status of exposed child. J Crohns Colitis 2025;19:jjaf049.40127036
18 Palomino L, Rodríguez-Belvís MV, Casanova MJ, . Psychomotor development in infants following maternal exposure to biologics: Results from the DUMBO registry. Clin Gastroenterol Hepatol 2026;24:1688-701.40518059
19 Urrete J, Mitra T, Boland BS, . Vedolizumab does not affect antibody secreting cell recruitment to the lactating mammary gland of mothers with inflammatory bowel disease. Inflamm Bowel Dis 2025;31:290-3.38334263

## Substance Identification

### Substance Name

Vedolizumab

### CAS Registry Number

943609-66-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized

Gastrointestinal Agents